# Radium Ra 223 Dichloride

CASRN: 444811-40-9

## Drug Levels and Effects

### Summary of Use during Lactation

Radium-223 dichloride is not indicated for use in women and should not be given to nursing mothers. However, if a nursing mother receives radium-223 dichloride, she should permanently discontinue nursing her current infant.[1]

### Drug Levels

Radium-223 has a physical half-life of 11.4 days and emits alpha particles with a decay energy of 5.979 MeV upon decay.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf

## Substance Identification

### Substance Name

Radium Ra 223 Chloride

### CAS Registry Number

444811-40-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Radiopharmaceuticals

Radionuclides

Radium